# Desirudin

CASRN: 120993-53-5

## Drug Levels and Effects

### Summary of Use during Lactation

Desirudin is no longer marketed in the United States. Because no information is available on the use of desirudin during breastfeeding, an alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

## Substance Identification

### Substance Name

Desirudin

### CAS Registry Number

120993-53-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants